# Anastrozole

CASRN: 120511-73-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of anastrozole during breastfeeding. The manufacturer recommends that nursing mothers not breastfeed during anastrozole treatment and for at least 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Anastrozole

### CAS Registry Number

120511-73-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents, Hormonal

Aromatase Inhibitors